# Alglucosidase Alfa

CASRN: 420784-05-0

## Drug Levels and Effects

### Summary of Use during Lactation

A maternal dose of alglucosidase 20 mg/kg every 2 weeks produces low levels in milk and does not appear to increase alphaglucosidase activity in the bloodstream of infants. Many infants have been breastfed during maternal alglucosidase therapy. No special precaution are necessary.

### Drug Levels

Maternal Levels. One 40-year-old woman with adult-onset Pompe disease received alglucosidase alfa during pregnancy and lactation in an intravenous dose of 20 mg/kg every 2 weeks. The alglucosidase activity in breastmilk before the injection was 3 nmol/hour.ml, Which was about 10% of what the authors had measured in the milk of an unaffected woman. Breastmilk activity peaked 2.5 hours after the end of the infusion at 245 nmol/h.mL, which was 0.3% of the peak plasma value. Direct measurement of alglucosidase alfa in the breastmilk of the normal mother and the mother receiving the drug were consistent with these activity measurements. Alglucosidase alfa was undetectable (assay limit not stated) 24 hours after the end of the infusion.[1]

A paper reported the range of milk levels of alphaglucosidase from five healthy lactating women, with 3 to 4 samples each. Milk levels ranged from 4.1 to 7.5 micromol/L/hour of acid alphaglucosidase activity.[2]

Infant Levels. Acid alphaglucosidase activity was measured in 15 dried blood spots from an infant whose mother was receiving alglucosidase alfa 20 mg/kg every 2 weeks. Samples taken at various times after the maternal infusion had values ranging from about 1 to 9 micromol/L/hour of acid alphaglucosidase activity. In comparison, the mother’s blood acid alphaglucosidase activities before a dose were 2.3 micromol/L/hour and 169 micromol/L/hour 4 hours after a dose.[2]

### Effects in Breastfed Infants

An infant was born to a mother receiving alglucosidase alfa during pregnancy and lactation in an intravenous dose of 20 mg/kg every 2 weeks for adult-onset Pompe disease. At 3 and 77 days of age, the infant’s serum had negligible anti-alglucosidase alfa antibodies. The infant was examined regularly up to 1 year of age and showed normal development, although the extent of breastfeeding during this time was not stated.[1]

Two infants were born to mothers who received alglucosidase alfa therapy for Pompe disease during pregnancy and lactation. The two infants breastfed for a combined total of 22 months. Regular follow-up indicated normal development of both infants and a lack of side effects.[3]

A woman with juvenile Pompe disease was treated with recombinant human alglucosidase alfa (Myozyme, Sanofi Genzyme) at a dose 20 mg/kg every 2 weeks beginning at 16 years of age. At age 21, she continued therapy throughout pregnancy and during breastfeeding, with the instruction to defer breastfeeding for 24 hours after the start of the infusion. The infant had normal development at 6 months of age.[4]

A woman with late-onset Pompe disease was treated with alglucosidase starting after delivery. The infant was breastfed, with the instruction not to breastfeed for 24 hours after each infusion. At 2 months postpartum, therapy was changed to avalglucosidase. At 8 months postpartum, the infant was developing normally.[5]

Two women with late-onset Pompe disease were receiving alglucosidase 20 mg/kg intravenously every 2 weeks during pregnancy and postpartum. One of them breastfed 2 children while taking this dose. All infants were exclusively breastfed for 6 months and partially thereafter. All of the children were developing normally at follow-up at the ages of 4 years and 1 month, 2 years and 6 months, and 2 year and 2 months, and 9 months.[2]

Four women with Pompe disease breastfed their infants during alglucosidase alfa treatment. Three were instructed to avoid breastfeeding for 24 hours after each dose. No side effects were reported.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 de Vries JM, Brugma JD, Özkan L, . First experience with enzyme replacement therapy during pregnancy and lactation in Pompe disease. Mol Genet Metab 2011;104:552-5.21967859
2 Bachmann M, Kasper D, Scholl-Bürgi S, . Enzyme replacement therapy during pregnancy and breastfeeding in late-onset Pompe disease. Int Breastfeed J 2025;20:92.41462273
3 Grosz Z, Javor L, Molnar JM. The safety of enzyme replacement therapy during pregnancy and lactation in Pompe disease-a longitudinal follow up. Eur J Neurol 2020;27 (Suppl 1):697. doi:10.1111/ene.14308
4 Nampoothiri S, Yesodharan D, Kuthiroly S, . Successful pregnancy outcome in a patient with Pompe disease receiving enzyme replacement therapy: A case report and review of the literature. Arch Clin Med Case Rep 2022;6:137-48. doi:10.26502/acmcr.96550461
5 Yanagihara C, Hayasaka Y, Kageyama Y. Pregnancy during enzyme replacement therapy with alglucosidase alfa over a 14-year period in late-onset Pompe disease. Neurol Clin Neurosci 2023;11:97-9. doi:10.1111/ncn3.12695
6 Theunissen MTM, Hayat Z, Bouhour F, . Managing Pompe Disease and Enzyme Replacement Therapy During Pregnancy: Challenges and Considerations. Eur J Neurol 2026;33:e70648.42347567

## Substance Identification

### Substance Name

Alglucosidase Alfa

### CAS Registry Number

420784-05-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy